# Oseltamivir

CASRN: 196618-13-0

## Drug Levels and Effects

### Summary of Use during Lactation

Limited data indicate that oseltamivir and its active metabolite are poorly excreted into breastmilk. Maternal dosages of 150 mg daily produce low levels in milk and would not be expected to cause any adverse effects in breastfed infants. Infants over 2 weeks of age can receive oseltamivir directly in doses much larger than those in breastmilk.

### Drug Levels

Maternal Levels. A nursing mother who was 9 months postpartum was given oseltamivir 75 mg by mouth twice daily for 5 days. She collected 8 milk samples within 30 minutes of taking an oseltamivir dose and 2 after the last dose. Milk was analyzed for oseltamivir and its carboxylate metabolite. Oseltamivir milk concentrations fluctuated depending on the time of the milk sample, but oseltamivir carboxylate concentrations were generally higher and reached a steady-state between 37 to 39 mcg/L after 3 days of therapy. The authors calculated that at worst, the infant would receive 0.012 mg/kg daily, compared to the dosage for infants over 2 weeks of age of 3 mg/kg daily. The dose in milk corresponded to 0.5% of the mother's weight-adjusted dosage.[1]

Seven postpartum women who were bottle feeding their infants donated milk samples at the time of and 0.5, 1, 2, 4, 8, 12, and 24 hours after a single 75 mg oral dose of oseltamivir. Both oseltamivir and its metabolite, oseltamivir carboxylate were measured in milk samples. The average peak milk level of oseltamivir of 26.9 mcg/L occurred at an average of 3.4 hours after the dose and the average peak milk level of oseltamivir carboxylate of 41.9 mcg/L occurred at an average of 18.9 hours after the dose. Using area under the curve (AUC) data reported in the paper and the standardized milk intake of 150 mL/kg daily, a fully breastfed infant would receive daily dosages of about 0.9 mcg/kg of oseltamivir and 3.6 mcg/kg of oseltamivir carboxylate. These values would be doubled with the usual dosage of 75 mg twice daily, but the sum of these entities is far below the dose reportedly used in infants of 3 mg/kg daily.[2]

Six women with influenza were receiving oseltamivir 75 mg twice daily for 5 days. Oseltamivir and its active metabolite oseltamivir carboxylate were measured in breastmilk at 0, 1, 2, 4, 6, 8, 10, and 12 hours after the seventh dose of the drug. The peak oseltamivir concentration was found at 1.3 hours after the dose and was 69.5 mcg/L. Its half-life in milk was 2.1 hours. The peak oseltamivir carboxylate concentration was found at 5.3 hours after the dose and was 38.4 mcg/L. Its half-life in milk was 12.5 hours. Although the study was not powered to measure colostrum and breastmilk separately, the study found no significant difference in the pharmacokinetics between colostrum collected within 5 days of birth in 3 women and breastmilk from 3 women who were 13 days postpartum.[3]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Zanamivir

### References

1 Wentges-van Holthe N, van Eijkeren M, van der Laan JW. Oseltamivir and breastfeeding. Int J Infect Dis 2008;12:451.18243025
2 Greer LG, Leff RD, Rogers VL, et al. Pharmacokinetics of oseltamivir in breast milk and maternal plasma. Am J Obstet Gynecol 2011;204:524.e1-4.21457910
3 Fodor E, Nagy RN, Nógrádi A, et al. An observational study on the pharmacokinetics of oseltamivir in lactating influenza patients. Clin Pharmacol Ther 2024;115:318-23.37975276

## Substance Identification

### Substance Name

Oseltamivir

### CAS Registry Number

196618-13-0

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Infective Agents

Antiviral Agents

Neuraminidase Inhibitors